# Norovirus Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

An investigational bivalent oral norovirus vaccine increased milk IgA in breastmilk and it remained above placebo levels for 180 days.

### Drug Levels

Maternal Levels. An oral bivalent norovirus vaccine (viral capsid protein of GI.1 and GII.4) was studied in south Africa. Sixteen women were given a placebo, 30 were in the medium-dose group (5 x 10^10^ IU/genotype), and 30 were in the high-dose group (1x 10^11^ IU/genotype). Vaccinated medium and high-dose groups’ highest levels of GI.1-specific breastmilk IgA were observed on day 29 post vaccination, with a mean fold rise of 5.57 and 4.04, respectively, compared to 1.40 in the placebo group. Breastmilk GI.1-specific IgA remained above baseline through day 180 with a mean fold rise of 2.28 and 2.08 in the medium and high-dose groups compared to 1.35 in the placebo group. Infant stool IgA concentrations were also increased.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Braun MR, Nguyen LQ, Flitter BA, et al. Transfer of breast milk IgA to infants after oral bivalent norovirus vaccination of post-partum women. NPJ Vaccines 2026 41530181

## Substance Identification

### Substance Name

Norovirus Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines